# Flibanserin

CASRN: 167933-07-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of flibanserin during breastfeeding. Because flibanserin is 98% bound to human serum proteins, the amounts in milk are likely to be low. However, the manufacturer states that flibanserin is not recommended in breastfeeding women.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Flibanserin

### CAS Registry Number

167933-07-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Serotonin 5-HT1 Receptor Agonists

Serotonin 5-HT2 Receptor Antagonists